# Orlistat

CASRN: 96829-58-2

## Drug Levels and Effects

### Summary of Use during Lactation

Orlistat is poorly absorbed orally, but a small amount has been detected in the milk of one woman. It is unlikely that orlistat will be absorbed by the infant in amounts that would adversely affect the breastfed infant. Because it inhibits the absorption of fat-soluble vitamins, mothers using it should take a multivitamin supplement at bedtime.

### Drug Levels

Maternal Levels. Orlistat was detected in the milk of one mother at a concentration of 2.3 ng/gram of milk. Because milk donors were anonymized in the study, it was not known if the mother was taking orlistat or at what dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Musatadi M., Gonzalez-Gaya B., Irazola M., et al. (2021). Multi-target analysis and suspect screening of xenobiotics in milk by UHPLC-HRMS/MS. Separations.

## Substance Identification

### Substance Name

Orlistat

### CAS Registry Number

96829-58-2

### Drug Class

Breast Feeding

Lactation

Enzyme Inhibitors

Anti-Obesity Agents